# Delafloxacin

CASRN: 189279-58-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of delafloxacin during breastfeeding. Fluoroquinolones have traditionally not been used in infants because of concern about adverse effects on the infants' developing joints. However, recent studies indicate little risk.[1,2] The calcium in milk might prevent absorption of fluoroquinolones in milk,[3] but insufficient data exist to prove or disprove this assertion. Use of delafloxacin is acceptable in nursing mothers. However, it is preferable to use an alternate drug for which safety information is available.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin

### References

1 Gürpinar AN, Balkan E, Kiliç N, et al. The effects of a fluoroquinolone on the growth and development of infants. J Int Med Res 1997;25:302-6.9364293
2 van den Oever HL, Versteegh FG, Thewessen EA, et al. Ciprofloxacin in preterm neonates: Case report and review of the literature. Eur J Pediatr 1998;157:843-5.9809826
3 Fleiss PM. The effect of maternal medications on breast-feeding infants. J Hum Lact 1992;8:7.1558663

## Substance Identification

### Substance Name

Delafloxacin

### CAS Registry Number

189279-58-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Fluoroquinolones

Quinolones